# (14C)-Glycocholic Acid

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of (14C)-glycocholic acid as a diagnostic agent. Breastfeeding does not need to be suspended after administration of (14C)-glycocholic acid.[1,2]

### Drug Levels

Carbon 14 is a low-energy beta emitter with a physical half-life of about 5730 years. (14C)- glycocholic acid has an effective half-life of 143 hours. Approximately 9.2% of the injected radioactivity is excreted into breastmilk.[1]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Leide-Svegborn S, Ahlgren L, Johansson L, et al. (2016). Excretion of radionuclides in human breast milk after nuclear medicine examinations. Biokinetic and dosimetric data and recommendations on breastfeeding interruption. Eur J Nucl Med Mol Imaging.
2 Mattsson S, Johansson L, Leide Svegborn S, et al. (2015). Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP.

## Substance Identification

### Substance Name

(14C)-Glycocholic Acid

### Drug Class

Breast Feeding

Lactation

Radiopharmaceuticals

Carbon Radioisotopes

Diagnostic Agents